# Artesunate

CASRN: 88495-63-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that a maternal dose of 200 mg orally produced low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. Withholding breastfeeding for 6 hours after a dose should markedly reduce the dose the infant receives.

In general, very small amounts of antimalarial drugs are excreted in the breast milk of lactating women. Because the quantity of antimalarial drugs transferred in breast milk is insufficient to provide adequate protection against malaria, infants who require chemoprophylaxis must receive the recommended dosages of antimalarial drugs.[1]

### Drug Levels

Maternal Levels. After a single oral dose of 200 mg of artesunate given to nursing mothers (number not stated), artesunate was undetectable in breastmilk (<5 mcg/L) at any time. The active metabolite, dihydroartemisinin, reached a peak concentration in breastmilk of about 35 mcg/L at 90 minutes after the dose, and was undetectable (<2.5 mcg/L) 6 hours after the dose.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Breastfed infants who were given dihydroartemisinin and piperaquine as a treatment for malaria had a higher frequency of vomiting than non-breastfed infants given the drugs. Whether this finding applies to infants who receive dihydroartemisinin via breastmilk has not been studied.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Malaria. In: Centers for Disease Control and Prevention. CDC Yellow Book 2026: Health Information for International Travel. 2026. https://www.cdc.gov/yellow-book/hcp/travel-associated-infections-diseases/malaria.html#treatment
2 Jansen FH, Jansen-Luts A, Ameye C, . Is artesunate or its active metabolite dihydroartemisinin being excreted in the milk of lactating mothers? Am J Trop Med Hyg 2006;75 (5 Suppl):158. doi:10.4269/ajtmh.2006.75.151
3 Creek D, Bigira V, Arinaitwe E, . Increased risk of early vomiting among infants and young children treated with dihydroartemisinin-piperaquine compared with artemether-lumefantrine for uncomplicated malaria. Am J Trop Med Hyg 2010;83:873–5.20889882

## Substance Identification

### Substance Name

Artesunate

### CAS Registry Number

88495-63-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents